# Gold Sodium Thiomalate

CASRN: 39377-38-3

## Drug Levels and Effects

### Summary of Use during Lactation

Excretion of gold into milk after gold sodium thiomalate has not been rigorously studied. Case reports indicate that gold appears in milk in small quantities and at least a little of it is absorbed because it is detectable in the infant's urine. No convincing cases of toxicity have been reported. Monitoring for possible adverse effects in the breastfed infant would seem prudent. Opinions of authors of review articles vary from recommending avoidance to allowing use.[1-5] Since gold salts are rarely used any longer, an alternative is preferred.

### Drug Levels

Maternal Levels. The milk of one mother contained 22 mcg/L after a total dose of gold sodium thiomalate of 370 over a 7-week period and 40 mcg/L after 395 mg over about 8 weeks.[6]

Gold levels reached a peak of 30 mcg/L 17 hours after a 20 mg intramuscular dose of gold sodium thiomalate and persisted at about the same levels for at least 72 hours when another dose of 50 mg was administered. A peak milk level of 153 mcg/L was measured 22 hours after this dose and fluctuated around this level until at least 42 hours after the dose. In another mother reported in the same paper, peak milk level of 15 mcg/L occurred 36 hours after a dose of 10 mg. Following a subsequent dose of 20 mg, a peak milk level of 140 mcg/L occurred at 24 hours and 165 mcg/L at 69 hours after the dose. A third 20 mg dose resulted in a level of 185 mcg/L 3 hours after the dose when collection was stopped.[7]

A woman received gold sodium thiomalate during pregnancy and after delivery in dose of 10 mg every 3 to 4 weeks. Milk levels ranged between 15 and 30 mcg/L after the postpartum doses.[8]

Infant Levels. Gold was detectable in an infant's urine at a level of 0.4 mcg/L after a cumulative maternal dose of 370 mg over a 7-week period. One month later, gold was undetectable (<0.4 mcg/L) in the infant's urine after another maternal dose of 20 mg during this time.[6]

A woman received gold sodium thiomalate during pregnancy and after delivery in dose of 10 mg every 3 to 4 weeks. Gold was detected in the infant's urine in a concentration of 51 mcg/L on one occasion 21 days after the previous dose.[8]

### Effects in Breastfed Infants

Four infants reportedly have been breastfed during maternal gold therapy (including gold sodium thiomalate and gold aurothioglucose).[6,8-10] Transient facial edema occurred in an 18-month-old infant, 3 months after the mother's treatment stopped.[6] The reaction was possibly due to gold in the mother's milk ingested by the infant.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Rheumatoid Arthritis) Etanercept, Hydroxychloroquine, Infliximab, Methotrexate, Penicillamine, Sulfasalazine

### References

1 Østensen M. Treatment with immunosuppressive and disease modifying drugs during pregnancy and lactation. Am J Reprod Immunol 1992;28:148-52.1285866
2 Rayburn WF. Connective tissue disorders and pregnancy. Recommendations for prescribing. J Reprod Med 1998;43:341-9.9583066
3 Janssen NM, Genta MS. The effects of immunosuppressive and anti-inflammatory medications on fertility, pregnancy and lactation. Arch Intern Med 2000;160:610-9.10724046
4 Ramsey-Goldman R, Schilling E. Optimum use of disease-modifying and immunosuppressive antirheumatic agents during pregnancy and lactation. Clin Immunother 1996;5:40-58. doi:10.1007/BF03259314
5 Brooks PM, Needs CJ. Antirheumatic drugs in pregnancy and lactation. Baillieres Clin Rheumatol 1990;4:157-71.2282661
6 Bell RA, Dale IM. Gold secretion in maternal milk. Arthritis Rheum 1976;19:1374.826260
7 Østensen M, Skavdal K, Myklebust G, et al. Excretion of gold into human breast milk. Eur J Clin Pharmacol 1986;31:251-2.3100315
8 Bennett PN, Humphries SJ, Osborne JP, et al. Use of sodium aurothiomalate during lactation. Br J Clin Pharmacol 1990;29:777-9.2116162
9 Blau SP. Metabolism of gold during lactation. Arthritis Rheum 1973;16:777-8.4757877
10 Sørensen SS. Pharmacodynamic examination of patients treated with gold preparations. Nord Med 1970;84:1508.5494985

## Substance Identification

### Substance Name

Gold Sodium Thiomalate

### CAS Registry Number

39377-38-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antirheumatic Agents